# Factor Xa (recombinant), Inactivated

CASRN: 1262449-58-0

## Drug Levels and Effects

### Summary of Use during Lactation

Coagulation factor Xa (andexanet alfa) has been removed from the market in the United States because of the clotting risk. No information is available on the clinical use of coagulation factor Xa during breastfeeding. Because it is a large protein molecule with a molecular weight of about 40,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[1] Until more data become available, coagulation factor X should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003

## Substance Identification

### Substance Name

Factor Xa (recombinant), Inactivated

### CAS Registry Number

1262449-58-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Blood Coagulation Factors

Coagulants